# Pramipexole

CASRN: 104632-26-0

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of pramipexole during breastfeeding, but it suppresses serum prolactin and may interfere with breastfeeding. An alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information in nursing mothers was not found as of the revision date. Pramipexole lowers serum prolactin.[1-3] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### References

1 Schilling JC, Adamus WS, Palluk R. Neuroendocrine and side effect profile of pramipexole, a new dopamine receptor agonist, in humans. Clin Pharmacol Ther 1992;51:541-8.1350237
2 Daniel JS, Govindan JP, Kamath C, et al. Newer dopaminergic agents cause minimal endocrine effects in idiopathic Parkinson's disease. Clin Med Insights Endocrinol Diabetes 2014;7:13-7.24855402
3 Picchietti DL, Hensley JG, Bainbridge JL, et al. Consensus clinical practice guidelines for the diagnosis and treatment of restless legs syndrome/Willis-Ekbom disease during pregnancy and lactation. Sleep Med Rev 2015;22:64-77.25553600

## Substance Identification

### Substance Name

Pramipexole

### CAS Registry Number

104632-26-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiparkinson Agents

Dopamine Agonists